# Codeine

CASRN: 76-57-3

## Drug Levels and Effects

### Summary of Use during Lactation

Numerous professional organizations and regulatory agencies recommend that other agents are preferred over codeine or to avoid codeine completely during breastfeeding;[1-5] however, these recommendations appear to be based on one case report that has since been discredited, and large population studies have not found codeine to be more dangerous than other opioids that have been studied less and may not be safer.[6-8] Maternal use of any oral opioid in high dosages during breastfeeding can cause infant drowsiness, which can progress to more severe central nervous system depression.[9,10] Newborn infants seem to be particularly sensitive to the effects of even small dosages of narcotic analgesics. If the mother of a newborn requires codeine, it is not a reason to discontinue breastfeeding; however, once the mother’s milk comes in, it is best to provide pain control with a nonnarcotic analgesic and limit maternal intake of oral codeine to 2 to 3 days at a low dosage with close infant monitoring, especially in the outpatient setting.[10-14] If the baby shows signs of increased sleepiness (more than usual), difficulty breastfeeding, breathing difficulties, or limpness, a physician should be contacted immediately.[15] Excessive sedation in the mother often correlates with excess sedation in the breastfed infant. Following these precautions can lower the risk of neonatal sedation.[16] Withdrawal symptoms can occur in breastfed infants when maternal administration of an opioid analgesic is stopped, or when breastfeeding is stopped.

### Drug Levels

Codeine is metabolized via CYP2D6 to morphine (5%), norcodeine (15%), and further to codeine-6-glucuronide (80%) and morphine-6-glucuronide by UGT2B7. Codeine itself has very weak analgesic activity. The morphine and codeine-6-glucuronide metabolites are responsible for codeine’s analgesic properties. Both CYP2D6 and UGT2B7 are subject to genetic variability, which can alter the amount of active narcotic excreted into breastmilk. The plasma clearance of morphine is prolonged in newborn infants compared to older infants and children.[10,13,17] Pharmacokinetic models of maternal codeine use during breastfeeding have shown that neonatal toxicity from codeine and morphine in milk is possible, but unlikely.[10,13,14]

Maternal Levels. Two mothers who were 7 and 13 weeks postpartum were given a single 60 mg dose of oral codeine. Milk was collected over 12 hours in the first subject and over 48 hours in the second. Codeine and morphine were detected in the milk of both subjects with peak codeine levels in milk occurring 1 hour after the dose. The peak codeine milk level was 455 mcg/L in the first subject and about 450 to 550 mcg/L in the second. The half-life of codeine in breastmilk was 2.5 hours. Morphine milk levels were 16 mcg/L and 9 mcg/L 1 hour after the dose in the 2 subjects. Elimination of morphine from milk occurred very slowly over 36 hours. The authors calculated an average milk level from 0 to 12 hours after a single codeine 60 mg dose to be 140 mcg/L for codeine and 9 mcg/L for morphine. They also estimated an average steady-state codeine milk concentration of 351 mcg/L and morphine milk concentration of 42 mcg/L from a codeine dose of 60 mg every 4 hours.[18] Using the average milk level data from this study, including the contribution of the morphine metabolite, an exclusively breastfed infant would receive an estimated maximum dose of 11 mcg/kg in the 12 hours after a single 60 mg maternal dose and 59 mcg/kg daily from a maternal dosage regimen of 60 mg taken every 4 hours. The amounts of codeine and morphine in milk in this study represent an infant dosage of about 1.2% of the maternal weight-adjusted codeine dosage. The typical neonatal dose of codeine is 500 mcg/kg every 6 to 8 hours. The levels of codeine-6-glucuronide were not measured in this study and thus, results likely underestimate complete infant exposure to active substances in milk from maternal codeine use.

Seven mothers who were 1 to 3 days postpartum and were taking codeine 60 mg every 4 to 6 hours for an average of 4 doses had foremilk sampled up to 6 hours after a dose. One mother’s serial milk levels at 0.5, 1, 2, and 4 hours after the dose were 71, 71, 199, and 126 mcg/L for codeine and 8.5, 9.1, 11.2, and 12.7 mcg/L for morphine, respectively. Using these levels, a calculated average milk level is 124 mcg/L for codeine and 9.6 mcg/L for morphine. The range of measured milk levels from all subjects was 33.8 to 314 mcg/L for codeine and 1.9 to 20.5 mcg/L morphine. Time to codeine milk level peak was variable. The subject with the highest measured milk codeine level of 314 mcg/L had this measurement 3.5 hours after her fifth dose. One subject had a measurable milk codeine level 35 hours after her twelfth dose.[19,20] Using the calculated average codeine milk level, including the contribution of the morphine metabolite, an exclusively breastfed infant would receive an estimated maximum 20 mcg/kg daily from a maternal dosage regimen of 60 mg taken every 4 hours. This represents an infant dosage of 0.3% of the maternal weight adjusted dosage. Using the peak codeine and morphine milk levels from this study, an exclusively breastfed infant would receive an estimated maximum of 50 mcg/kg daily from a maternal dosage regimen of 60 mg taken every 4 to 6 hours. This represents 1% of the maternal weight-adjusted dosage. The typical neonatal dose of codeine is 500 mcg/kg every 6 to 8 hours. The levels of codeine-6-glucuronide were not measured in this study and thus, results likely underestimate complete infant exposure to active substances in milk from maternal codeine use.

Infant Levels. Plasma samples from 11 healthy, term, 1- to 3-day-old infants of 11 mothers taking codeine for postpartum analgesia were drawn 1 to 4 hours after completion of breastfeeding. The mothers had taken an average of 4 doses of oral codeine 60 mg every 4 to 6 hours for analgesia prior to infant plasma sampling. One hour after a dose the mean infant serum codeine level was 1.86 mcg/L (range 0.8 to 4.5 mcg/L). At 2 hours the mean was 1.15 mcg/L (range 0.8 to 1.5 mcg/L). At 4 hours the mean was 1.4 mcg/L (range of 0.8 to 3.3 mcg/L). Mean infant serum morphine levels were 0.86 mcg/L at 1 hour, 0.58 mcg/L at 2 hours and 0.8 mcg/L at 4 hours. The morphine to codeine ratio was higher in infant serum than in milk, possibly due to conversion of codeine to morphine in the infants. The authors noted that the infant serum codeine and morphine levels reported in this study are lower than known therapeutic plasma levels reported in adults and neonates treated with codeine or morphine for analgesia.[20] The levels of codeine-6-glucuronide were not measured in this study and thus, results likely underestimate infant exposure to active substances in milk from maternal codeine use.

### Effects in Breastfed Infants

Codeine was reported to be the possible cause of asymptomatic bradycardia 6 days following a single maternal 30 mg codeine dose in a week-old, term, exclusively breastfed infant.[21] This seems implausible.[7]

Four probable cases of apnea associated with maternal codeine intake of 60 mg every 4 to 6 hours were reported in 4- to 6-day-old term and near-term breastfed infants. Apnea resolved 24 to 48 hours after withholding breast feeding and discontinuation of maternal codeine.[22]

In a case-control study of 12 breastfed term newborns with unexplained episodes of apnea, bradycardia or cyanosis during the first week of life, maternal oral codeine use was determined to be the probable cause. A higher proportion of newborns with episodes, 83 vs 31%, had mothers using opiates, including codeine, for postpartum analgesia. The mean number of doses taken was also higher with mothers of case newborns taking a mean of 10 doses (range 4 to 22) vs. 5 doses (range 1 to 13) in the control group. There were no differences in other perinatal and demographic factors between cases and controls.[23] The authors recommended discontinuation of breastfeeding if infants of mothers taking opiate analgesics have unexplained negative cardiorespiratory symptoms.

No apnea, bradycardia, or color changes occurred in 11 healthy, term, 1- to 3-day-old newborn breastfed infants exposed to codeine in milk. Their mothers had taken an average of 4 doses of oral codeine 60 mg every 4 to 6 hours prior to breastfeeding.[20]

In one telephone follow-up study, 19% (5 of 26) of breastfeeding mothers taking multiple doses of codeine reported drowsiness in their infants. All infants were younger than 1 month. The authors added that the elimination half-life of codeine’s metabolite, morphine, is prolonged in the newborn period which may explain why the adverse reaction was reported in only infants younger than 1 month.[24]

A large case-control study of 504 children with neuroblastoma found a statistically significant 2.4-fold association of the disease with maternal use of opioid agonists during pregnancy and lactation. This finding was largely attributable to a 3.4-fold association with maternal codeine use. Opioid exposure during lactation had a 3.5-fold association while codeine exposure had a 5.1-fold association. Because neuroblastoma is a sympathetic nervous system tumor arising from the progenitor cells of the sympathetic ganglia and adrenal medulla, and because codeine does cross the placenta and is transferred to milk, the authors of this study speculate that codeine’s neuroendocrine effects could disrupt adrenal gland development in the fetus and neonate thus contributing to neuroblastoma.[25]

A breastfed infant became increasingly sleepy and lethargic starting on day 7 of life. The infant developed gray skin and decreased milk intake on day 12 of life and died on day 13 of life. The infant’s mother was taking acetaminophen with codeine prescribed for post-episiotomy pain at a codeine dose of 60 mg every 12 hours on days 1 and 2 postpartum, and 30 mg every 12 hours for 2 weeks (although the dose was later reported to be 30 mg every 6 hours [7]). The mother was reportedly an ultrarapid metabolizer of codeine who excreted large amounts of morphine into her breastmilk.[18] The role that codeine and its pharmacogenetics played in the infant’s death has been questioned and the paper was retracted by two Canadian journals where the case was originally published and questioned by the editors of Lancet where the case was also published.[7,10,26-28] This case was ultimately found to be false and misleading, because the autopsy report found unmetabolized codeine in the infant’s stomach, which indicates that the drug was given directly to the infant.[29] The authors of the original case report later conducted a retrospective case-control study of 72 women who had taken codeine while breastfeeding found that 24% of the mothers reported decreased alertness in their infants which improved after codeine or breastfeeding discontinuation. The affected infants were more likely to have visited an emergency room for symptoms such as lethargy, poor feeding or breathing difficulties. Mothers with affected infants took an average of 1.62 mg/kg daily or codeine compared to an average of 1.02 mg/kg daily in mothers of unaffected infants. The lowest maternal dose reported cause symptoms in the breastfed infant was 0.63 mg/kg daily. Usually, the mothers of affected infants also had signs of central nervous system depression. Another woman was also an ultrarapid codeine metabolizer in addition to the first case reported. She took 120 mg of codeine daily and her infant was very drowsy and fed poorly and the mother was sedated, nauseated, dizzy, and weak during codeine use. The mother transitioned to complete formula feeding by day 7 postpartum and noted a complete reversal of her infant’s symptoms although she remained symptomatic.[30]

A study compared the frequency of drowsiness in breastfed infants whose mothers took acetaminophen plus codeine to infants whose mothers took acetaminophen alone. Infants exposed to codeine had a 16.7% frequency of drowsiness compared to 0.5% of those exposed to acetaminophen alone. Mothers who had infants with drowsiness took about 50% higher doses of codeine than those with no drowsiness.[31]

In a retrospective study, nursing mothers who were taking either codeine, oxycodone or acetaminophen for pain while breastfeeding were contacted by telephone to ascertain the degree of maternally perceived central nervous system (CNS) depression. Some of the mothers taking codeine had previously been reported in reference [30]. Mothers taking codeine reported signs of CNS depression in 17% (35/210) of their infants, while those taking acetaminophen reported infant CNS depression in only 0.5% (1/184) of their infants. Women who reported infant sedation were taking 1.4 mg/kg daily of oxycodone, and unaffected were taking 0.9 mg/kg daily. Affected infants had more hours of daily uninterrupted sleep than unaffected infants, and 4 of the affected infants had been taken to the emergency department for lethargy. Thirty of 35 mothers reported that infant sedation ceased with maternal codeine discontinuation. Mothers of affected infants were also more likely to experience lethargy and other side effects than mothers of unaffected infants. Mothers who took oxycodone reported a similar rate of infant sedation (20%) compared to codeine, but the groups were statistically different in parity and postmenstrual age (PMA), with the codeine group having a slightly higher PMA.[32]

A retrospective cohort study of women with publicly funded prescription coverage in the province of Ontario, Canada compared 7804 women who filled a codeine prescription within 7 days postpartum to 7804 who did not over a 10-year period. No difference was found in any adverse infant outcomes during the first 30 days of life between the two groups, including hospitalization for various causes.[33] However, study design problems appear to have limited this study, including a lack of knowledge of maternal codeine dosage ingested, timing of codeine ingestion, and extent of nursing.[34] In a similar, but larger study in Ontario, 17,037 mothers who filled a codeine prescription were matched on propensity score to an equal number of mothers who did not. Compared with infants born to mothers who were not prescribed an opioid, those born to mothers prescribed codeine were less likely to be admitted to hospital in the 30 days after the index date (hazard ratio 0.74). Admissions for jaundice and feeding difficulties were less common among infants of mothers who filled a codeine prescription than among infants of mothers who did not fill a codeine prescription. No infant deaths occurred. Of note is that the median drug supply was for 3 days (IQR 2 to 4 days).[8]

Six cases of CNS depression in infants breastfed by mothers taking codeine were reported over a 2-year period in Canada. Maternal dosages that were reported were in the range of 2 to 3 mg/kg daily. Infants were all 10 days of age or younger and responded favorably to discontinuation of nursing, discontinuation of maternal codeine or naloxone injection.[34]

A mother noted her 2-month-old breastfed (extent not stated) infant to be somnolent and slept more than usual for 2 to 3 days. The baby’s mother had a total of 4 or 5 tablets of acetaminophen 500 mg plus codeine 30 mg as needed for back pain for the prior 3 days. The mother discontinued the medication and breastfeeding. Under observation at an emergency room, the infant slowly recovered. A serum morphine level was not obtained.[35]

A review of 10 years of reports to the European adverse drug reaction database EudraVigilance found 3 unspecified serious adverse reactions reported in breastfed infants associated with codeine, but apparently no deaths. Further details of the cases were not reported.[36]

### Effects on Lactation and Breastmilk

Narcotics can increase serum prolactin.[37] However, the prolactin level in a mother with established lactation may not affect her ability to breastfeed.

### Alternate Drugs to Consider

(Analgesia) Acetaminophen, Butorphanol, Hydromorphone, Ibuprofen, Morphine; (Antitussive) Dextromethorphan

### References

1 United States Food and Drug Administration. FDA Drug Safety Communication: FDA restricts use of prescription codeine pain and cough medicines and tramadol pain medicines in children; recommends against use in breastfeeding women. 2017;April 20 https://www.fda.gov/Drugs/DrugSafety/ucm549679.htm
2 Lazaryan M, Shasha-Zigelman C, Dagan Z, . Codeine should not be prescribed for breastfeeding mothers or children under the age of 12. Acta Paediatr 2015;104:550-6.25809057
3 European Medicines Agency. Codeine-containing medicines. 2013;EMA/385716/2013 http://www.ema.europa.eu/ema/index.jsp?curl=pages/medicines/human/referrals/Codeine-containing_medicines/human_referral_prac_000008.jsp&mid=WC0b01ac05805c516f
4 Lamvu G, Feranec J, Blanton E. Perioperative pain management: An update for obstetrician-gynecologists. Am J Obstet Gynecol 2018;218:193-9.28666699
5 Mitchell J, Jones W, Morris S, . Guidelines for anaesthesia and sedation for patients who are breastfeeding: Guidelines from the Association of Anaesthetists. Anaesthesia 2026;81:685-701.41532178
6 Halder S, Russell R, Quinlan J. Codeine and breast-feeding mothers. Int J Obstet Anesth 2015;24:5-7.25578245
7 Zipursky J, Juurlink DN. The implausibility of neonatal opioid toxicity from breastfeeding. Clin Pharmacol Ther 2020;108:964-70.32378749
8 Zipursky JS, Gomes T, Everett K, . Maternal opioid treatment after delivery and risk of adverse infant outcomes: Population based cohort study. Bmj 2023;380:e074005.36921977
9 Madadi P, Shirazi F, Walter FG, . Establishing causality of CNS depression in breastfed infants following maternal codeine use. Paediatr Drugs 2008;10:399-404.18998750
10 Willmann S, Edginton AN, Coboeken K, . Risk to the breast-fed neonate from codeine treatment to the mother: A quantitative mechanistic modeling study. Clin Pharmacol Ther 2009;86:634-43.19710640
11 Nauta M, Landsmeer ML, Koren G. Codeine-acetaminophen versus nonsteroidal anti-inflammatory drugs in the treatment of post-abdominal surgery pain: A systematic review of randomized trials. Am J Surg 2009;198:256-61.19628064
12 Ito S. Opioids in breast milk: Pharmacokinetic principles and clinical implications. J Clin Pharmacol 2018;58 (Suppl 10):S151-S63.30248201
13 Anderson BJ, Hannam JA. Codeine and metabolite concentrations in the breastfed neonate. Paediatr Anaesth 2026;279:117575.
14 Rieder M. Codeine toxicity via breast Milk: Can this occur and implications for opiate therapy in children. Br J Clin Pharmacol 2026;92:3012-6.42324075
15 US Food and Drug Administration. Public Health Advisory. Use of codeine products in nursing mothers. 2007;Aug 17 http://www.fda.gov/Drugs/DrugSafety/PostmarketDrugSafetyInformationforPatientsandProviders/DrugSafetyInformationforHeathcareProfessionals/PublicHealthAdvisories/ucm054717.htm
16 Kelly LE, Chaudhry SA, Rieder MJ, . A clinical tool for reducing central nervous system depression among neonates exposed to codeine through breast milk. PLoS One 2013;8:e70073.23922910
17 Madadi P, Koren G. Pharmacogenetic insights into codeine analgesia: Implications to pediatric codeine use. Pharmacogenomics 2008;9:1267-84.18781855
18 Findlay JW, DeAngelis RL, Kearney MF, . Analgesic drugs in breast milk and plasma. Clin Pharmacol Ther 1981;29:625-33.7214793
19 Naumburg EG, Meny RG, Findlay J, . Codeine and morphine levels in breast milk and neonatal plasma. Pediatr Res 1987;21 (4, Pt 2):240A. doi:10.1203/00006450-198704010-00437
20 Meny RG, Naumburg EG, Alger LS, . Codeine and the breastfed neonate. J Hum Lact 1993;9:237-40.8260056
21 Smith JW. Codeine-induced bradycardia in a breast-fed infant. Clin Res 1982;30:259A.
22 Davis JM, Bhutani VK. Neonatal apnea and maternal codeine use. Pediatr Res 1985;19 (4 Pt 2):170A. doi:10.1203/00006450-198504000-00389
23 Naumburg EG, Meny RG. Breast milk opioids and neonatal apnea. Am J Dis Child 1988;142:11-2.3341293
24 Ito S, Blajchman A, Stephenson M, . Prospective follow-up of adverse reactions in breast-fed infants exposed to maternal medication. Am J Obstet Gynecol 1993;168:1393-9.8498418
25 Cook MN, Olshan AF, Guess HA, . Maternal medication use and neuroblastoma in offspring. Am J Epidemiol 2004;159:721-31.15051581
26 Tsuyuki RT, Pimlott N. Risks of maternal codeine intake in breast-fed infants: A joint statement of retraction from the Canadian Pharmacists Journal and Canadian Family Physician. Can Pharm J (Ott) 2021;154:7-8.33599627
27 Pimlott N, Tsuyuki RT. Risks of maternal codeine intake in breastfed infants: A joint statement of retraction from Canadian Family Physician and the Canadian Pharmacists Journal. Can Fam Physician 2020;66:793-6.33208416
28 The Editors Of The Lancet. Expression of concern: Pharmacogenetics of morphine poisoning in a breastfed neonate of a codeine-prescribed mother. Lancet 2026;407:659.41651002
29 Taub B. A fatal error. The New Yorker 2026;Feb 6:28-39.
30 Madadi P, Ross C, Hayden M, . Pharmacogenetics of neonatal opioid toxicity following maternal use of codeine during breastfeeding: A case-control study. Clin Pharmacol Ther 2009;85:31-5.18719619
31 Ciszkowski C, Madadi P, Sistonen J, . The incidence of CNS depression of neonates breastfed by mothers receiving codeine for postpartum analgesia. Clin Pharmacol Ther 2011;89 (Suppl. 1):S94. doi:10.1038/clpt.2010.335
32 Lam J, Kelly L, Ciszkowski C, . Central nervous system depression of neonates breastfed by mothers receiving oxycodone for postpartum analgesia. J Pediatr 2012;160:33-7.e2.21880331
33 Juurlink DN, Gomes T, Guttmann A, . Postpartum maternal codeine therapy and the risk of adverse neonatal outcomes: A retrospective cohort study. Clin Toxicol (Phila) 2012;50:390-5.22537257
34 Lam J, Matlow JN, Ross CJ, . Postpartum maternal codeine therapy and the risk of adverse neonatal outcomes: The devil is in the details. Ther Drug Monit 2012;34:378-80.22777151
35 Moranta F. Pharmaceutical enquiry by drowsiness in breastfed baby. Farmaceuticos Comunitarios 2016;8:42-4. doi:10.5672/FC.2173-9218.(2016/Vol8).004.06
36 Heerfordt IM, Gotfredsen DR, Horwitz H, . EudraVigilance insights: Suspected adverse drug reactions in infants through breastfeeding. Br J Clin Pharmacol 2025;91:2431-6.40190021
37 Tolis G, Dent R, Guyda H. Opiates, prolactin, and the dopamine receptor. J Clin Endocrinol Metab 1978;47:200-3.263291

## Substance Identification

### Substance Name

Codeine

### CAS Registry Number

76-57-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Analgesics, Opioid

Narcotics

Antitussive Agents